# Tigecycline

CASRN: 220620-09-7

## Drug Levels and Effects

### Summary of Use during Lactation

Tigecycline is a tetracycline antibiotic. A number of reviews have stated that tetracyclines are contraindicated during breastfeeding because of possible staining of infants’ dental enamel or bone deposition of tetracyclines. However, available literature indicates that infant harm is not likely with short-term use of a tetracycline during lactation. Tigecycline is 71 to 89% bound to plasma proteins, so milk levels are likely low and absorption by the infant is inhibited by the calcium in breastmilk. Although the manufacturer recommends avoiding breastfeeding during administration of tigecycline and for 9 days after the last dose, short-term use of tigecycline is probably acceptable in nursing mothers. As a theoretical precaution, avoid prolonged or repeat courses during nursing. Monitor the infant for rash and for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tigecycline

### CAS Registry Number

220620-09-7

### Drug Class

Breastfeeding

Lactation

Milk, Human

Anti-infective Agents

Antibacterial Agents

Tetracyclines